# Testosterone

CASRN: 58-22-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that a low-dose (100 mg) subcutaneous testosterone pellet given to a nursing mother appears not to increase milk testosterone levels markedly. Subcutaneous testosterone cypionate does increase milk testosterone levels. However, testosterone has low oral bioavailability because of extensive first-pass metabolism, so it appears to not increase serum testosterone levels in breastfed infants. Breastfed infants appear not to be adversely affected by maternal or transgender paternal testosterone therapy. High doses of testosterone can suppress lactation.

### Drug Levels

Maternal Levels. A woman received testosterone for depressive symptoms sublingually (drops, dose unspecified), vaginally (cream, dose unspecified), and subcutaneously (pellet, 100 mg). Foremilk samples were obtained at various times over the first 24 hours after administration of the sublingual and vaginal administration and on days 2, 3 and 7 after the implanting of the testosterone pellet. The highest milk level recorded following the pellet implantation was 101 ng/L on day 7. Testosterone levels in breastmilk were not increased above baseline with any of these preparations.[1]

A transgender male began receiving subcutaneous testosterone cypionate 50 mg weekly at 13.75 months after giving birth. The dose was increased to 80 mg weekly after 1 month. Trough foremilk samples were obtained at baseline, and just before doses at 4, 14, 28, 70 and 134 days after the first dose. The milk total testosterone level was 4.62 ng/L at baseline, 84 ng/L at 4 days after the first dose, 209 ng/L at 14 days after the first dose, 126 ng/L at 28 days after the first dose, 339 ng/L at 70 days after the first dose and 359 ng/L at 134 days after the first dose. The authors calculated the maximum relative infant dose to be 0.041%.[2]

Infant Levels. After implantation of a 100 mg pellet of testosterone subcutaneously in a postpartum woman, serum levels of testosterone in her breastfed infant (extent and age not stated) were <100 ng/L on days 2, 3 and 7, and at 5 months after the implanting of the testosterone pellet.[1]

A transgender male began testosterone in a standard dose (not stated) for female-to-male therapy 15 months after giving birth. He “chestfed” his infant (extent not stated) and at 21 months, the infant’s testosterone level was reportedly normal.[3]

A transgender male began receiving subcutaneous testosterone cypionate 50 mg weekly at 13.75 months after giving birth. The dose was increased to 80 mg weekly after 1 month. His male infant was chestfed (extent not stated). Infant total testosterone serum levels were undetectable (<70 ng/L) at the start of therapy and 4, 14, 28, 70 and 134 days after initiation of therapy.[2]

A transmasculine parent gave birth to an infant by cesarean section at 40 weeks gestation. After 6 months postpartum the patient began injectable testosterone (form not stated) therapy at a dose of 5 mg twice weekly, with the dosage adjusted to the upper limit of serum levels found in cisgender females. Testosterone levels were measured in the female infant at baseline, and 3 to 4 weeks, and 7 to 8 weeks after testosterone initiation. Free testosterone was too low to measure at all time points. Total testosterone was <0.2 nmol/L at baseline and <0.3 and <0.4 nmol/L at the subsequent times (normal <2 nmol/L). Sex hormone-binding globulin values were all in the normal range (60 to 252 nmol/L), with values of 199 nmol/L at baseline, and 282 and 155 nmol/L at the subsequent times.[4]

### Effects in Breastfed Infants

After implantation of a 100 mg pellet of testosterone subcutaneously in a postpartum mother, her infant (age not stated) was breastfed (extent not stated). No adverse effects were noted in the infant over a 5-month period.[1]

A transgender male began receiving subcutaneous testosterone cypionate 50 mg weekly 13.75 months after giving birth. The dose was increased to 80 mg weekly after 1 month. His male infant was partially chestfed (extent not stated) until the infant self-weaned at 137 days after initiation of testosterone (18 months of age). During this time, no adverse events or signs of virilization were noted by the infant’s pediatrician. The infant grew and developed normally.[2]

### Effects on Lactation and Breastmilk

Supraphysiologic serum levels of testosterone, either from a tumor[5,6] or from exogenously administered testosterone,[7] reduces milk production in postpartum women. Testosterone alone reduces serum prolactin;[7] however, when given in combination with estrogen and progestin, serum prolactin levels are not markedly reduced.[8] Testosterone was previously used therapeutically to suppress lactation, usually in combination with an estrogen.[7-13]

A transmasculine parent gave birth to an infant by cesarean section at 40 weeks gestation. After 6 months postpartum the patient began testosterone therapy, with the dosage adjusted to the upper limit of serum levels found in cisgender females. The parent successfully maintained chestfeeding while receiving testosterone therapy without complications.[4]

### References

1 Glaser RL, Newman M, Parsons M, et al. Safety of maternal testosterone therapy during breast feeding. Int J Pharm Compd 2009;13:314–7.23966521
2 Oberhelman-Eaton S, Chang A, Gonzalez C, et al. Initiation of gender-affirming testosterone therapy in a lactating transgender man. J Hum Lact 2022;38:339–43.34490813
3 MacDonald T, Noel-Weiss J, West D, et al. Transmasculine individuals' experiences with lactation, chestfeeding, and gender identity: A qualitative study. BMC Pregnancy Childbirth 2016;16:106.27183978
4 Oladimeji D, Adams B, Eastman L. Gender-affirming care during lactation: Case report of a transmasculine parent. Can Fam Physician 2026;72:e66–e7.41844307
5 Hoover KL, Barbalinardo LH, Platia MP. Delayed lactogenesis II secondary to gestational ovarian theca lutein cysts in two normal singleton pregnancies. J Hum Lact 2002;18:264–8.12192962
6 Betzold CM, Hoover KL, Snyder CL. Delayed lactogenesis II: A comparison of four cases. J Midwifery Womens Health 2004;49:132–7.15010666
7 Weinstein D, Ben-David M, Polishuk WZ. Serum prolactin and the suppression of lactation. Br J Obstet Gynaecol 1976;83:679–82.788774
8 Welti H, Paiva F, Felber JP. Prevention and interruption of postpartum lactation with bromocriptine (Parlodel) and effect on plasma prolactin, compared with a hormonal preparation (Ablacton). Eur J Obstet Gynecol Reprod Biol 1979;9:35–9.570523
9 Schwartz DJ, Evans PC, García CR, et al. A clinical study of lactation suppression. Obstet Gynecol 1973;42:599–606.4582587
10 Ng KH, Lee KH. Inhibition of postpartum lactation with single-dose drugs. Aust N Z J Obstet Gynaecol 1972;12:59–61.4502478
11 Morris JA, Creasy RK, Hohe PT. Inhibition of puerperal lactation. Double-blind comparison of chlorotrianesene, testosterone enanthate with estradiol valerate and placebo. Obstet Gynecol 1970;36:107–14.4912251
12 McNicol E, Struthers JO. A combined/oestrogen/progestogen/testosterone agent for the inhibition of lactation. Br J Clin Pract 1972;26:567–8.4567863
13 Iliya FA, Safon L, O'Leary JA. Testosterone enanthate (180 mg.) and estradiol valerate (8 mg.) for suppression of lactation: A double-blind evaluation. Obstet Gynecol 1966;27:643–5.5949195

## Substance Identification

### Substance Name

Testosterone

### CAS Registry Number

58-22-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Androgens

Hormones